# Theophylline

CASRN: 58-55-9

## Drug Levels and Effects

### Summary of Use during Lactation

Expert opinion considers use of theophylline to be acceptable during breastfeeding.[1,2] Maternal theophylline use may occasionally cause stimulation and irritability and fretful sleep in infants. Newborn and especially preterm infants are most likely to be affected because of their slow elimination and low serum protein binding of theophylline. There is no need to avoid theophylline products; however, keep maternal serum concentrations in the lower part of the therapeutic range and monitor the infant for signs of theophylline side effects. Infant serum theophylline concentrations can help to determine if signs of agitation are due to theophylline. Avoiding breastfeeding for 2 hours after intravenous or 4 hours after an immediate-release oral theophylline product can decrease the dose received by the breastfed infant. When theophylline is given as an oral sustained-release product, timing of nursing with respect to the dose is of little or no benefit.

### Drug Levels

Maternal Levels. Theophylline rapidly equilibrates between plasma and milk. Peak milk levels occur 1 to 3 hours after oral ingestion of immediate-release products and almost immediately after intravenous administration. Milk levels parallel serum levels closely and average about 70% of simultaneous maternal serum levels.[3,4] Assuming that each 1 mg/kg of maternal theophylline increases her serum level by 2 mg/L, an exclusively breastfed infant would receive about 21% of the maternal weight-adjusted dosage of theophylline or 17% of the maternal dosage of aminophylline.

A physiologically based pharmacokinetic model was created for theophylline that predicted an average relative infant dose of 13% and a maximum of 17%.[5]

Infant Levels. Theophylline is found in the serum of breastfed infants.[6] In newborn infants with typical theophylline clearance rates, infant serum levels are expected to be between 1 and 4 mg/L with a maternal serum level in the therapeutic range of 10 to 20 mg/L.[3] Infant serum levels might occasionally accumulate to therapeutic levels in infants with slow clearance rates of the drug.[7]

A physiologically based pharmacokinetic model was created for theophylline that predicted an average serum concentration in a preterm neonate was 6.8 mg/L.[5]

### Effects in Breastfed Infants

Irritability and fretful sleeping occurred in a 3-day-old breastfed infant on days of maternal aminophylline intake of 200 mg every 6 hours. These effects ceased with discontinuation and recurred on rechallenge over the next 9 months. These effects were probably caused by theophylline in breastmilk. Another five infants reported in this paper showed no adverse reactions after maternal theophylline ingestion.[4] Accumulation of theophylline in infant serum appears most likely in neonates and premature infants because they eliminate theophylline slowly.[3,7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Terbutaline

### References

1 National Heart, Lung, and Blood, Institute, National Asthma, Education, and, Prevention, Program, Asthma, and, Pregnancy, Working, Group. NAEPP expert panel report. Managing asthma during pregnancy: recommendations for pharmacologic treatment-2004 update. J Allergy Clin Immunol 2005;115:34-46.15637545
2 Middleton PG, Gade EJ, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208.31699837
3 Stec GP, Greenberger P, Ruo TI, et al. Kinetics of theophylline transfer to breast milk. Clin Pharmacol Ther 1980;28:404-8.7408400
4 Yurchak AM, Jusko WJ. Theophylline secretion into breast milk. Pediatrics 1976;57:518-20.1264548
5 Abduljalil K, Gardner I, Jamei M. Application of a physiologically based pharmacokinetic approach to predict theophylline pharmacokinetics using virtual non-pregnant, pregnant, fetal, breast-feeding, and neonatal populations. Front Pediatr 2022;10:840710.35652056
6 Gardner MJ, Schatz M, Cousins L, et al. Longitudinal effects of pregnancy on the pharmacokinetics of theophylline. Eur J Clin Pharmacol 1987;32:289-95.3595701
7 Reinhardt D, Richter O, Brandenburg G. Pharmacokinetics of drugs from the breast-feeding mother passing into the body of the infant, using theophylline as an example. Monatsschr Kinderheilkd 1983;131:66-70.6843559

## Substance Identification

### Substance Name

Theophylline

### CAS Registry Number

58-55-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Bronchodilator Agents